# Ibandronate

CASRN: 114084-78-5

## Drug Levels and Effects

### Summary of Use during Lactation

Ibandronate is poorly absorbed orally (average in adults 6% on an empty stomach, negligible with food), so absorption of ibandronate by a breastfed infant is unlikely. However, since no information is available on the use of ibandronate during breastfeeding, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Pamidronate

## Substance Identification

### Substance Name

Ibandronate

### CAS Registry Number

114084-78-5

### Drug Class

Breast Feeding

Lactation

Bisphosphonates

Bone Density Conservation Agents

Diphosphonates